# Chlordiazepoxide

CASRN: 58-25-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of chlordiazepoxide during breastfeeding. Because the drug and metabolites could accumulate in the breastfed infant, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. If chlordiazepoxide is used, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Chlordiazepoxide is metabolized to active compounds including demoxepam, desmethylchlordiazepoxide, desmethyldiazepam, and oxazepam. Chlordiazepoxide has a long half-life of 5 to 30 hours, and the half-lives of its metabolites range from 14 to 100 hours.

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Lorazepam, Oxazepam, Temazepam

## Substance Identification

### Substance Name

Chlordiazepoxide

### CAS Registry Number

58-25-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Anti-Anxiety Agents

Benzodiazepines